# Divalproex

CASRN: 76584-70-8

## Drug Levels and Effects

### Summary of Use during Lactation

Very little information is available on the clinical use of divalproex during breastfeeding. However, divalproex is rapidly metabolized in the body to the active drug valproic acid. Valproic acid levels in breastmilk are low and infant serum levels range from undetectable to low. Breastfeeding during valproic acid monotherapy does not appear to adversely affect infant growth or development, and breastfed infants had higher IQs and enhanced verbal abilities than nonbreastfed infants at 6 years of age in one study.[1] A safety scoring system finds valproic acid possible to use during breastfeeding.[2] If valproic acid is required by the mother, it is not necessarily a reason to discontinue breastfeeding.

No definite adverse reactions to valproic acid in breastfed infants have been reported. Theoretically, breastfed infants are at risk for valproic acid-induced hepatotoxicity, and a questionable case of thrombocytopenia has been reported. A rare case of infant baldness might have been caused by valproate in milk. Monitor the infant for jaundice and unusual bruising or bleeding. Combination therapy with sedating anticonvulsants or psychotropics may result in infant sedation or withdrawal reactions.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. A mother with epilepsy was taking valproic acid 2.4 grams daily and primidone 250 mg 3 times daily during pregnancy and postpartum. During the second week postpartum, a breastmilk valproic acid level was 7 mg/L, which was 7% of her serum level.[3]

A mother with epilepsy was taking valproic acid 1.6 grams daily in divided doses. The breastmilk level at 5 days postpartum was 7.2 mg/L; by 29 days postpartum, it had fallen to 3 mg/L.[4]

A woman was taking valproic acid 250 mg twice daily during pregnancy and postpartum. At 62 hours postpartum she had a milk level of 0.18 mg/L which was 16 hours after her last dose. At 130 hours postpartum she had a milk level of 0.46 mg/L which was 3 hours after her last dose.[5]

A woman taking valproic acid 250 mg twice daily had milk valproate levels of 2 mg/L 30 minutes after taking a dose. The milk level fell to 0.43 mg/L 1 hour later and to undetectable levels (<0.4 mg/L) an hour after that.[6]

The valproic acid level in the breastmilk of mothers 5 mothers taking valproic acid ranged between 0.4 to 3.9 mg/L. The dosages they were receiving was not stated, but milk levels ranged between 1.3 and 7.1% of the maternal plasma level.[7] This case series was extended to 16 women taking an average of 22.1 mg/kg daily of valproic acid. They had average milk valproate levels of 1.8 mg/L.[8]

In 6 women taking valproic acid in dosages ranging from 9.6 to 31 mg/kg daily, milk valproate levels ranged from 0.034 to 5.4 mg/L and levels of the metabolite 3-keto-valproate ranged from 0.04 to 0.48 mg/L.[9] Extension of the study to 13 patients did not markedly alter the results.[10]

Four women taking valproic acid (1 took 1.2 grams daily and 3 took 1.5 grams daily) had breastmilk valproate levels measured. Specific milk concentrations are not given, but milk levels were 5 to 10% of maternal serum levels, consistent with other studies. The authors estimated that a breastfed infant would receive only 6 mg in a liter of milk.[11]

Four mothers taking valproic acid (3 took 1.2 grams daily and 1 took 1.8 grams daily) during pregnancy and postpartum had breastmilk levels measured during the first week postpartum. The average breastmilk levels were 1.8 mg/L (range 1 to 3.8 mg/L).[12]

One woman taking valproic acid 1 gram daily had milk levels of 3, 2.3 and 1.4 mg/L on postpartum days 6, 7, and 17, respectively. Another woman was taking valproic acid 1.4 gram plus carbamazepine 600 mg and diazepam 2 mg daily. Milk valproate levels were 2, 1.4, 3.5, 2.3 and 2.8 mg/L on postpartum days 1, 3, 15, 29, and 43, respectively.[13]

A case series of 30 patients taking valproic acid reported milk levels collected between day 6 and 32 postpartum (median 7 days), mostly in the morning before the first dose of the day. Seventeen were taking valproic acid monotherapy, with or without clonazepam, in a mean dosage of 11.3 mg/kg daily. Sixteen milk levels that were measured had a mean milk valproate level of 1.6 mg/L (range <1 to 13.3 mg/L). Three mothers were taking valproic acid plus the enzyme inhibitor lamotrigine in a mean dosage of 11.2 mg/kg daily. Two milk levels that were measured had milk valproate levels <1 mg/L. Nine were taking valproic acid plus an enzyme-inducing drug in a mean dosage of 14.6 mg/kg daily. Ten milk levels that were measured had a mean milk valproate level of 2.1 mg/L (range <1 to 16.7 mg/L). No correlation was observed between the maternal serum levels and milk levels measured at the same time.[14]

Infant Levels. The breastfed infant of an epileptic mother who was taking valproic acid 1.6 grams daily in divided doses had serum valproic acid level of about 7.5 mg/L on day 5 of life that fell to undetectable levels by day 29.[4]

A 2-month-old breastfed infant was nursed by a mother taking valproic acid 250 mg twice daily. Infant serum levels were undetectable (<0.3 mg/L) before nursing and reached a peak of 14 mg/L 30 minutes after nursing which was 2 hours after the mother's dose. The serum level fell to 7 mg/L 1.5 hours later.[6]

The infant of a mother who was taking valproic acid monotherapy 600 mg twice daily had a serum valproic acid level of 6.6 mg/L at 3 months of age.[15]

Two infants whose mothers were taking valproic acid monotherapy for bipolar disorder were studied. A 1-month-old infant had a serum valproate level of 4 mg/L during maternal therapy with 750 mg daily in divided doses. Another fully breastfed 3-month-old whose mother was taking 250 mg of valproic acid twice daily had a serum level of 1 mg/L.[16]

Two breastfed infants whose mothers were taking valproic acid 500 mg daily for bipolar disorder had undetectable (<3.5 and <5 mcg/L) serum valproate levels. Both mothers were also taking clonazepam; one was also taking trifluoperazine and the other was taking fluoxetine.[17]

Four exclusively breastfed infants whose mothers began taking valproic acid monotherapy postpartum in dosages of 750 or 1000 mg daily had average serum levels of 1 mg/L which averaged 1.8% of their mothers' serum levels. Another infant that was 80% breastfed during maternal treatment with 1 gram daily had a serum level of 0.7 mg/L or 1% of the maternal serum level. A sixth infant that was 50% breastfed during maternal treatment with 1 gram daily had a serum level of 0.7 mg/L or 1.2% of the maternal serum level. All infant serum levels were taken between 4 and 19 weeks of age.[18]

A case series of 30 women taking valproic acid had their infants' serum valproate levels measured between day 6 and 32 postpartum (median 7 days), mostly in the morning before the first dose of the day. The extent and timing of breastfeeding were not reported. Seventeen mothers were taking valproic acid monotherapy, with or without clonazepam, in a mean dosage of 11.3 mg/kg daily. Eighteen infant serum levels that were measured had a mean of 3.7 mg/L (range <1 to 11.6 mg/L), with a mean ratio of maternal to infant serum level of 0.1. Three mothers were taking valproic acid plus the enzyme inhibitor lamotrigine in a mean dosage of 11.2 mg/kg daily. Four infant serum levels that were measured had a mean of 4.5 mg/L (range <1 to 6.6 mg/L), with a mean ratio of maternal to infant serum level of 0.12. Nine mothers were taking valproic acid plus an enzyme-inducing drug in a mean dosage of 14.6 mg/kg daily. Eleven infant serum levels that were measured had a mean valproate level of 5.1 mg/L (range <1 to 17.5 mg/L), with a mean ratio of maternal to infant serum level of 0.14. No correlation was observed between the maternal serum levels and infant serum levels measured at the same time.[14]

In a multicenter study of nursing mother-infant pairs, 2 infants had blood samples taken at about the same time as maternal blood samples. Neither of the infants had blood levels of valproic acid above the lower limit of quantification (15 mg/L). The authors estimated the average infant valproic acid serum concentration to be 7.5 mg/L, assuming unquantifiable serum concentrations to be 50% of the lower limit of quantification. Median infant blood levels were 17.2% (range 12.4 to 22%) of their mothers’ blood levels.[19]

### Effects in Breastfed Infants

A mother with epilepsy was taking valproic acid 2.4 grams daily and primidone 250 mg 3 times daily during pregnancy and postpartum. During the second week postpartum, her breastfed infant was sedated. Breastfeeding was stopped and the drowsiness cleared.[3] The sedation was possibly caused by primidone in breastmilk although valproic acid might have contributed by increasing primidone levels.

Petechiae, thrombocytopenia, anemia, and mild hematuria occurred in a 2.5-month-old breastfed infant whose mother was taking valproic acid 600 mg twice daily. Blood hemoglobin and reticulocytes normalized between 12 and 19 days after discontinuing breastfeeding. The petechiae resolved 35 days after discontinuing breastfeeding and the infant's platelet count had almost reached the normal range by this time. By day 83, the infant's platelet count was well within the normal range. The authors believed the adverse effect to be caused by valproic acid in breastmilk.[15] However, other authors believe that these symptoms were more likely caused by idiopathic thrombocytopenic purpura following a viral infection.[18]

Two breastfed infants aged 1 and 3 months whose mothers were taking valproic acid monotherapy 750 and 500 mg daily developed normally and had no abnormal laboratory values. Their plasma levels were 6% and 1.5% or their mother's serum levels, respectively.[16]

Six breastfed infants whose mothers were taking valproic acid 750 or 1000 mg daily had no adverse reactions to valproic acid in breastmilk.[18]

An exclusively breastfed infants whose mother was taking valproate 1.8 g, topiramate 300 mg, and levetiracetam 2 g, daily during pregnancy and lactation appeared healthy to the investigators throughout the 6- to 8-week study period.[20]

In a long-term study on infants exposed to anticonvulsants during breastfeeding, no difference in average intelligence quotient at 3 years of age was found between infants who were breastfed (n = 11) a median of 6 months and those not breastfed (n = 24) when their mothers were taking valproate monotherapy.[21] At 6 years of age, extensive psychological and intelligence testing found that the breastfed infants had statistically significantly higher IQ values (106 vs 94), than the nonbreastfed infants.[1]

A prospective cohort study in Norway followed infants of mothers who took antiepileptic drugs during pregnancy and lactation and compared them to infants of mothers with untreated epilepsy and infants with fathers who took antiepileptics as control groups. Of the 223 mothers studied, 27 were taking valproate monotherapy. Infants were assessed at 6, 18 and 36 months of age. Continuous breastfeeding in children of women using antiepileptic drugs was associated with no greater impaired development than those with no breastfeeding or breastfeeding for less than 6 months.[22,23]

A woman with bipolar disorder who delivered twins and was taking sodium valproate in a therapeutic dosage was started on quetiapine 200 mg and olanzapine 15 mg at 11 pm daily after 20 days postpartum. She withheld breastfeeding during the night and discarded milk pumped at 7 am. She then breastfed her infants until 11 pm. The mother continued feeding the infants on this schedule for 15 months. Monthly follow-up of the infants indicated normal growth and neither the pediatricians nor the parents noted any adverse effects in the infants.[24]

The 4-month-old breastfed infant of a mother taking divalproex for bipolar disorder developed patchy hair loss. The extent of nursing and dosage of divalproex were not stated. Divalproex was discontinued and 2 months later, the infant’s hair was normal.[25] The hair loss was possibly caused by valproate.

A review of 10 years of reports to the European adverse drug reaction database EudraVigilance found 7 unspecified serious adverse reactions reported in breastfed infants associated with valproic acid. Further details of the cases were not reported.[26]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Bipolar Disorder) Lithium, Olanzapine, Quetiapine, Risperidone, Valproic Acid; (Migraine Prophylaxis) Erenumab, Metoprolol, Nortriptyline, Propranolol, Rimegepant, Topiramate, Valproic Acid; (Seizure Disorder) Carbamazepine, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Meador KJ, Baker GA, Browning N, et al. Breastfeeding in children of women taking antiepileptic drugs: Cognitive outcomes at age 6 years. JAMA Pediatr 2014;168:729–36.24934501
2 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118–e26.30601177
3 Espir ML, Benton P, Will E, et al. Sodium valproate (Epilim) - some clinical and pharmacological aspects. In: Legg N, ed. Clinical and pharmacological aspects of sodium valproate in the treatment of epilepsy: Proceedings of a symposium. Turnbridge Wells, England: MCS Consultants; 1976:145–51.
4 Alexander FW. Sodium valproate and pregnancy. Arch Dis Child 1979;54:240.373647
5 Dickinson RG, Harland RC, Lynn RK, et al. Transmission of valproic acid (Depakene) across the placenta: Half-life of the drug in mother and baby. J Pediatr 1979;94:832–5.376803
6 Bardy AH, Granstrom ML, Hiilesmaa VK. Valproic acid and breast-feeding. In: Janz D, Bossi L, Dam M, Helge H, Richens A, Schmidt D, eds. Epilepsy, pregnancy and the child. New York: Raven Press; 1982:359–60.
7 Froescher W, Eichelbaum M, Niesen M, et al. Antiepileptic therapy with carbamazepine and valproic acid during pregnancy and lactation period. In: Dam M, ed. Advances in epileptology: XIIth epilepsy international symposium. New York: Raven Press; 1981:581–8.
8 von Unruh GE, Froescher W, Hoffmann F, et al. Valproic acid in breast milk: How much is really there? Ther Drug Monit 1984;6:272–6.6438834
9 Nau H, Rating D, Koch S, et al. Valproic acid and its metabolites: Placental transfer, neonatal pharmacokinetics, transfer via mother's milk and clinical status in neonates of epileptic mothers. J Pharmacol Exp Ther 1981;219:768–77.6795343
10 Nau H, Helge H, Luck W. Valproic acid in the perinatal period: Decreased maternal serum protein binding results in fetal accumulation and neonatal displacement of the drug and metabolites. J Pediatr 1984;104:627–34.6423793
11 Philbert A, Pedersen B, Dam M. Concentration of valproate during pregnancy, in the newborn and in breast milk. Acta Neurol Scand 1985;72:460–3.3936331
12 Meyer FP, Quednow B, Potrafki A, et al. The perinatal pharmacokinetics of anticonvulsant drugs. Zentralbl Gynakol 1988;110:1195–205.3239295
13 Tsuru N, Maeda T, Tsuruoka M. Three cases of delivery under sodium valproate-placental transfer, milk transfer and probable teratogenicity of sodium valproate. Jpn J Psychiatry Neurol 1988;42:89–96.3135429
14 Kacirova I, Grundmann M, Brozmanova H. Valproic acid concentrations in nursing mothers, mature milk, and breastfed infants in monotherapy and combination therapy. Epilepsy Behav 2019;95:112–6.31035102
15 Stahl MM, Neiderud J, Vinge E. Thrombocytopenic purpura and anemia in a breast-fed infant whose mother was treated with valproic acid. J Pediatr 1997;130:1001–3.9202628
16 Wisner KL, Perel JM. Serum levels of valproate and carbamazepine in breastfeeding mother-infant pairs. J Clin Psychopharmacol 1998;18:167–9.9555601
17 Birnbaum CS, Cohen LS, Bailey JW, et al. Serum concentrations of antidepressants and benzodiazepines in nursing infants: A case series. Pediatrics 1999;104:e11.10390297
18 Piontek CM, Baab S, Peindl KS, et al. Serum valproate levels in 6 breastfeeding mother-infant pairs. J Clin Psychiatry 2000;61:170–2.10817100
19 Birnbaum AK, Meador KJ, Karanam A, et al. Antiepileptic drug exposure in infants of breastfeeding mothers with epilepsy. JAMA Neurol 2020;77:441–50.31886825
20 Johannessen SI, Helde G, Brodtkorb E. Levetiracetam concentrations in serum and in breast milk at birth and during lactation. Epilepsia 2005;46:775–7.15857447
21 Meador KJ, Baker GA, Browning N, et al. Effects of breastfeeding in children of women taking antiepileptic drugs. Neurology 2010;75:1954–60.21106960
22 Vajda F. Epilepsy: Effects of exposure to antiepileptic drugs during development. Nat Rev Neurol 2014;10:11–2.24323050
23 Veiby G, Engelsen BA, Gilhus NE. Early child development and exposure to antiepileptic drugs prenatally and through breastfeeding: A prospective cohort study on children of women with epilepsy. JAMA Neurol 2013;70:1367–74.24061295
24 Aydin B, Nayir T, Sahin S, et al. Olanzapine and quetiapine use during breastfeeding: Excretion into breast milk and safe breastfeeding strategy. J Clin Psychopharmacol 2015;35:206–8.25679127
25 Govindan K, Mandadi GD. Alopecia in breastfed infant possibly due to mother getting valproate. Indian J Pediatr 2021;88:519–20.32557138
26 Heerfordt IM, Gotfredsen DR, Horwitz H, et al. EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431–6.40190021

## Substance Identification

### Substance Name

Divalproex

### CAS Registry Number

76584-70-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Antimanic Agents

GABA Agents